# Calendula

CASRN: 84776-23-8; 70892-20-5

## Drug Levels and Effects

### Summary of Use during Lactation

Calendula (Calendula officinalis) flowers contain triterpene glycosides and aglycones, carotenoids, and essential oils. Topical application of calendula products has been used to treat sore and cracked nipples during nursing, either in homeopathic or pharmacologic preparations,[1-3] although little high-quality evidence supports this use.[4] One uncontrolled case series found that a cream containing Mimosa tenuiflora and Calendula officinalis was useful for healing cracked nipples during breastfeeding;[5] however, the lack of a control group and the presence of another ingredient makes the evaluation of Calendula's efficacy impossible. Calendula has also been used topically in combination with Echinacea angustifolia (Calendit-E) for sore nipples in a study of modest quality in which the combination was found to be more effective than breastmilk.[6,7] Oral Calendula has no specific lactation-related uses and no information is available on the oral use of Calendula during breastfeeding. Calendula is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration when used as a seasoning or flavoring. Allergic reactions, including cross-reactions to chrysanthemums, daisies and marigolds, occur rarely.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kaplan B. (1994). Homoeopathy: 2. In pregnancy and for the under-fives. Prof Care Mother Child.
2 Stapleton H. (1995). The use of herbal medicine in pregnancy and labour. Part II: Events after birth, including those affecting the health of babies. Complement Ther Nurs Midwifery.
3 Petrie KA, Peck MR. (2000). Alternative medicine in maternity care. Prim Care.
4 Amir LH, Pirotta MV, Raval M. (2011). Breastfeeding - Evidence based guidelines for the use of medicines. Aust Fam Physician.
5 Mucci M, Sciocchetti M, Benvenuti C. (2006). Clinical efficacy and safety of Mimosa tenuiflora bark extract in the rhagades of the nipple. G Ital Ostet Ginecol.
6 Pezeshki B, Pouredalati M, Zolala S, et al. (2020). Comparison of the effect of aloe vera extract, breast milk, calendit-E, curcumin, lanolin, olive oil, and purslane on healing of breast fissure in lactating mothers: A systematic review. Int J Pediatr-Mashhad.
7 As'adi N, Kariman N. (2018). Herbal prevention and treatment of nipple trauma and/or pain in Iranian studies: A systematic review. J Herbmed Pharmacol.

## Substance Identification

### Substance Name

Calendula

### Scientific Name

Calendula officinalis

### CAS Registry Number

84776-23-8; 70892-20-5

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal